# Bilberry

CASRN: 84082-34-8

## Drug Levels and Effects

### Summary of Use during Lactation

Bilberry (Vaccinium myrtillus) fruit contains tannins and anthocyanidins. Bilberry is most often used for eye disorders. Bilberry was reportedly used as a European folk medicine to stop milk flow. No data exist on the excretion of any components of bilberry into breastmilk or on the safety and efficacy of bilberry in nursing mothers or infants. Bilberry preparations are generally well tolerated as a food, but should be avoided in patients allergic to bilberry, cranberry, blueberry, and other Vaccinium species. No recommendations can be made on the use of large quantities of bilberry products during breastfeeding.

Dietary supplements do not require pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Bilberry

### Scientific Name

Vaccinium myrtillus

### CAS Registry Number

84082-34-8

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal